# Anacaulase

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the clinical use of anacaulase during breastfeeding. Because it consists of plant enzymes the amount in milk is likely to be very low and it is likely to be partially destroyed in the infant's gastrointestinal tract and absorption by the infant is probably minimal. If anacaulase is required by the mother, it is not a reason to discontinue breastfeeding.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

## Substance Identification

### Substance Name

Anacaulase

### CAS Registry Number

### Drug Class

Breast Feeding

Lactation

Milk, Human

Enzymes